# Nemolizumab

CASRN: 1476039-58-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of nemolizumab during breastfeeding. Because nemolizumab is a large protein molecule with a molecular weight of about 144,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[2] Until more data become available, nemolizumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[3] Elevated serum prolactin and galactorrhea has been reported during therapy in a nonlactating patient.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A 14-year-old girl developed galactorrhea after the initiation of nemolizumab, which became progressively worse with each successive dose. Galactorrhea temporarily resolved when the dosing interval was extended and symptoms gradually improved after drug discontinuation. The patient’s serum prolactin was also elevated and returned to the normal range after drug discontinuation. The symptoms probably were caused by nemolizumab.[4]

### References

1 Stratigakis A, Paty D, Zou P, . A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
4 Sakai H, Oi T, Yoshioka K, . A case of galactorrhea and hyperprolactinemia following nemolizumab administration. Pediatr Int 2026;68:e70494.42482493

## Substance Identification

### Substance Name

Nemolizumab

### CAS Registry Number

1476039-58-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized